# Vestronidase Alfa

CASRN: 1638194-78-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of vestronidase alfa during breastfeeding. Because vestronidase alfa is a large protein molecule with a molecular weight of about 290,000, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. If vestronidase alfa is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, vestronidase alfa should be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Vestronidase Alfa

### CAS Registry Number

1638194-78-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Glucuronidase

Chondroitinsulfatases